# LactMed - Database Creation and Peer Review Process

## Primary Author

Philip O. Anderson, Pharm.D., FASHP, originated LactMed and is responsible for compiling and summarizing the scientific literature and for crafting its "Summary of Use" statements. A graduate of the University of California San Francisco (UCSF) School of Pharmacy, Dr. Anderson is a Health Sciences Clinical Professor of Pharmacy at the University of California San Diego Skaggs School of Pharmacy and Pharmaceutical Sciences. Dr. Anderson has published on drug use during breastfeeding in professional journals, and has authored the appendix to the popular handbook, The Nursing Mothers' Companion, and has lectured widely on the topic. He is a member of the Editorial Board AND Pharmacology Editor of the journal, Breastfeeding Medicine, and a member of the Scientific Advisory Board for the MotherToBaby, San Diego.

### Assisted by:

Jason Sauberan, Pharm.D. wrote the records for opioid drugs. Dr. Sauberan is a Health Sciences Assistant Clinical Professor of Pharmacy at the UCSD Skaggs School of Pharmacy and Pharmaceutical Sciences and is a neonatal-perinatal clinical pharmacist practicing at Neonatal Research Institute, Sharp Mary Birch Hospital for Women and Newborns, San Diego, California. He is also a member of the Scientific Advisory Board for the MotherToBaby, San Diego.

## Editorial and informatics support were provided by the Division of Specialized Information Services, National Library of Medicine.

### Data Peer Reviewed by:

The LactMed peer review panel scrutinizes the data for each drug record to assure their scientific validity, reasonableness, and currency. The initial peer reviewers for the database helped to design the format and scope of content.

Cheston M. Berlin, Jr., M.D. is a continuing reviewer of LactMed records. Dr. Berlin is a Professor of Pediatrics and Pharmacology at Pennsylvania State University Milton S. Hershey Medical Center in Hershey, PA. He has researched and published widely on drugs and breastfeeding and was a member of the American Academy of Pediatrics (AAP) Committee on Drugs which produced the Academy's Statement, "The Transfer of Drugs and Other Chemicals into Human Milk".

Shinya Ito, M.D., ABCP, FRCPC, is a continuing reviewer of LactMed records. Dr. Ito is Professor of Pediatrics, University of Toronto, and a staff physician at Division of Clinical Pharmacology and Toxicology, Hospital for Sick Children, Toronto, Ontario, Canada. His research is focused on drug safety in children, including those exposed to drugs in utero or through breast milk

Kathleen Uhl, M.D., FAAFP was one of the original reviewers for LactMed. Dr. Uhl is the former Director of the Office of Women's Health at the U.S. Food and Drug Administration and Supervisory Medical Officer in FDA's Center for Drug Evaluation and Research Pregnancy and Lactation Labeling Team in the Office of New Drugs.

#### Specialty Reviewers:

Cathi Dennehy, Pharm. D. is a reviewer for dietary supplement records. She is a Health Sciences Clinical Professor in the Department of Clinical Pharmacy in the School of Pharmacy at the University of California, San Francisco (UCSF). Her areas of specialty are herbal medicine and dietary supplements. Dr. Dennehy co-coordinates an evidence-based course in herbal remedies and dietary supplements at UCSF, sponsored by the Osher Center for Integrative Medicine. She conducts research and has authored publications and book chapters involving dietary supplements. She is also nationally recognized for her expertise as a consultant and professional speaker on this topic area.

Deborah Kennedy, M.B.A., N.D. is a reviewer for dietary supplement records. She is a licensed naturopathic doctor. Her area of research includes the interactions between natural health products and pharmaceutical drugs.

Sonia Neubauer, M.D. is a reviewer for radiopharmaceutical records. Dr. Neubauer is an Adjunct Professor at the University of Chile. Since 1979, she has been involved in clinical and basic investigational nuclear medicine in Chile, as well as at the Centre Antoine Lacassagne, University of Nice, in France.

Candy Tsourounis, Pharm.D. is a reviewer for dietary supplement records. She is a Professor of Clinical Pharmacy in the Department of Clinical Pharmacy in the School of Pharmacy at the University of California, San Francisco. Dr. Tsourounis' area of research involves dietary supplements. She has been involved in the dietary supplement field since 1994, authoring numerous articles and contributing meaningful research in this field, particularly in the area of dietary supplement use and safety.

The composition of the panel is subject to change as the database evolves.